# Black Currant Seed Oil

CASRN: 97676-19-2

## Drug Levels and Effects

### Summary of Use during Lactation

Black currant (Ribes nigrum) seed oil contains alpha and gamma-linolenic acid, anthocyanins, proanthocyanidin, flavonoids, vitamin C, and 2 nitrile-containing compounds. It is generally well tolerated. Some evidence exists that indicated supplementation of mothers with black currant seed oil during pregnancy and exclusive breastfeeding decreases the rate of atopic dermatitis in breastfed infants.[1] Heating breastmilk to 63.5 degrees C reduces the concentration of linolenic acid by about 22%. Freezing milk at -20 degrees C and thawing more than once decreases linolenic acid concentration by an average of 63%.[2]

Dietary supplements do not require extensive pre-marketing approval from the U.S. Food and Drug Administration. Manufacturers are responsible to ensure the safety, but do not need to prove the safety and effectiveness of dietary supplements before they are marketed. Dietary supplements may contain multiple ingredients, and differences are often found between labeled and actual ingredients or their amounts. A manufacturer may contract with an independent organization to verify the quality of a product or its ingredients, but that does not certify the safety or effectiveness of a product. Because of the above issues, clinical testing results on one product may not be applicable to other products. More detailed information about dietary supplements is available elsewhere on the LactMed Web site.

### Drug Levels

Maternal Levels. Relevant published information was not found as of the revision date.

Infant Levels. Relevant published information was not found as of the revision date.

### Effects in Breastfed Infants

In one study, supplementation of mothers with GLA had no effect on the development of atopic dermatitis in their breastfed infants.[3]

Nursing mothers were randomly selected from a larger blinded study comparing black currant seed oil (containing 48% linoleic acid, alpha-linoleic acid 13%, gamma linoleic acid 14%; Aromtech Ltd, Tornio, Finland) 3 grams daily to olive oil 3 grams daily as a placebo. Intake started between the 8th and 16th week of pregnancy and continuing postpartum until the end of exclusive breastfeeding. The selected mothers consisted of 31 who received black current seed oil and 30 who received placebo. Exclusive breastfeeding lasted 3.9 months in the black currant seed oil group and 4.2 months in the control group. Breastmilk levels of interleukins 4, 5, 10 and 12 were lower and levels of interferon-gamma were higher in the black current seed oil group. No difference was found in breastmilk levels of tumor necrosis factor. Mothers of children who developed atopic dermatitis by the age of 12 months had lower levels of IFN-gamma in their breastmilk.[1,4]

### Effects on Lactation and Breastmilk

Relevant published information was not found as of the revision date.

### References

1 Linnamaa P, Nieminen K, Koulu L, et al. (2013). Black currant seed oil supplementation of mothers enhances IFN-gamma and suppresses IL-4 production in breast milk. Pediatr Allergy Immunol.
2 Wardell JM, Hill CM, D'Souza SW. (1981). Effect of pasteurization and of freezing and thawing human milk on its triglyceride content. Acta Paediatr Scand.
3 Kitz R, Rose MA, Schonborn H, et al. (2006). Impact of early dietary gamma-linolenic acid supplementation on atopic eczema in infancy. Pediatr Allergy Immunol.
4 Linnamaa P, Savolainen J, Koulu L, et al. (2010). Blackcurrant seed oil for prevention of atopic dermatitis in newborns: A randomized, double-blind, placebo-controlled trial. Clin Exp Allergy.

## Substance Identification

### Substance Name

Black Currant Seed Oil

### Scientific Name

Ribes nigrum

### CAS Registry Number

97676-19-2

### Drug Class

Breast Feeding

Lactation

Complementary Therapies

Oils

Phytotherapy

Plants, Medicinal